# Pyrimethamine

CASRN: 58-14-0

## Drug Levels and Effects

### Summary of Use during Lactation

No adverse reactions in breastfed infants have been reported during maternal pyrimethamine use. It is acceptable to use in nursing mothers. In HIV-infected women, elevated viral HIV loads in milk were decreased after treatment with chloroquine to a greater extent than other women who were treated with the combination of sulfadoxine and pyrimethamine.[1] It has been suggested that maternal pyrimethamine clearance might be increased during lactation, but data are insufficient to make a definitive conclusion.[2,3]

### Drug Levels

Maternal Levels. Pyrimethamine milk levels have been reported after doses of 25, 50 or 75 mg in African women. In one woman who received a dose of 25 mg, the milk level was 2.17 mg/L at 3 hours after the dose, 2.65 mg/L at 6 hours after the dose, 2 mg/L at 24 hours after the dose and 1 mg/L at 48 hours after the dose. In two women who received 50 mg doses, milk levels were 3.24 and 3.25 mg/L at 6 hours after the dose, 1.17 and 1.66 mcg/ at 24 hours after the dose, and 0.66 and 1 mg/L at 48 hours after the dose. In 16 women who received doses of 75 mg, milk levels averaged 2.7 mg/L at 3 hours after the dose, 3.2 mg/L at 6 hours after the dose, 1.7 mg/L at 24 hours after the dose, and 1.2 mg/L at 48 hours after the dose. Reported milk levels were not proportional to the dose in this old study using an antiquated assay method.[4,5]

Three women were given a single dose of pyrimethamine 12.5 mg orally 2 to 5 days postpartum. Milk samples were obtained periodically for about 9 days after the dose. Assuming a daily intake of 1 L of milk, the infants would receive 0.14, 0.21 and 0.34 mg in milk over the study period. The authors calculated that these values equated to an average of 30% (range 16.8 to 45.6%) of the maternal weight-adjusted dosage.[6]

A physiologically based pharmacokinetic model has been developed that adequately predicts pyrimethamine excretion into breastmilk.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Administration of pyrimethamine to mothers of 26 predominantly breastfed infants 2 to 6 months old who were infected with malaria was curative in the infants.] The regimen consisted of 75 mg followed by a subsequent dose of 50 to 75 mg 4 to 7 days later. The efficacy is apparently related to breastfeeding habits, because infants in another tribal group who breastfed their infants less extensively were not protected. No adverse effects were reported in these infants.[4]

A case report indicates that a maternal dose of 75 mg orally followed by 25 mg weekly cured malaria in her breastfed infant and protected her infant against becoming infected with malaria for 6 months. After the mother missed taking her dose for 2 weeks, the infant developed symptoms of malaria.[8]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Malaria) Atovaquone and Proguanil, Chloroquine, Doxycycline, Mefloquine

### References

1 Semrau K, Kuhn L, Kasonde P, et al. Impact of chloroquine on viral load in breast milk. Trop Med Int Health 2006;11:800-3.16772000
2 Salman S, Davis TME. Regarding "Lactation status and studies of pyrimethamine pharmacokinetics in pregnancy". CPT Pharmacometrics Syst Pharmacol 2017;6:730.29064165
3 de Kock M, Tarning J, Barnes KI, et al. Response to "Lactation status and studies of pyrimethamine pharmacokinetics in pregnancy". CPT Pharmacometrics Syst Pharmacol 2017;6:731.29052341
4 Clyde DF, Press J, Shute GT. Transfer of pyrimethamine in human milk. J Trop Med Hyg 1956;59:277-84.13385913
5 Clyde DF. An examination of factors involved in the transfer of pyrimethamine in human milk. East Afr Med J 1957;34:81-5.13437933
6 Edstein MD, Veenendaal JR, Newman K, et al. Excretion of chloroquine, dapsone and pyrimethamine in human milk. Br J Clin Pharmacol 1986;22:733-5.3567020
7 Almond LM, Abduljalil K, Pansari A, et al. PBPK-led assessment of antimalarial drug concentrations in breastmilk: A strategy for optimal use of prediction methods to guide decision making in an understudied population. CPT Pharmacometrics Syst Pharmacol 2025;14:738–50.39930940
8 Clyde DF. Prolonged malaria prophylaxis through pyrimethamine in mothers' milk. East Afr Med J 1960;37:659-60.13694157

## Substance Identification

### Substance Name

Pyrimethamine

### CAS Registry Number

58-14-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents